# Tetanus Immune Globulin (Human)

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of tetanus immune globulin during breastfeeding. Tetanus immune globulin is an immune globulin (IgG) rich in IgG antibodies against tetanus toxin. IgG is a normal component of breastmilk that is likely to be partially destroyed in the infant's gastrointestinal tract and poorly absorbed by the infant. No special precautions are required during breastfeeding.

### Drug Levels

Maternal Levels. Colostrum (3 days postpartum) and milk (7 days postpartum) samples from 2 mothers who were receiving intravenous immunoglobulin (IVIG) for the treatment of common variable immunodeficiency were studied. One mother was receiving 400 to 500 mg/kg of IVIG monthly and the other received 600 to 700 mg/kg of IVIG monthly. The time of the last dose before sample collection was not reported. Immune globulin G (IgG) concentrations were normal in the first mother's colostrum and milk and higher than normal in the colostrum of the second mother. IgM levels were normal in the colostrum and milk first mother and low in the second.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Palmeira P, Costa-Carvalho BT, Arslanian C, et al. (2009). Transfer of antibodies across the placenta and in breast milk from mothers on intravenous immunoglobulin. Pediatr Allergy Immunol.

## Substance Identification

### Substance Name

Tetanus Immune Globulin (Human)

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies

Immunoglobulin G

Immunoglobulins